# Lactic Acid, Citric Acid, and Potassium Bitartrate

CASRN: 50-21-5; 77-92-9; 868-14-4

SID: 403031105; 403029880; 403033303

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of vaginal lactic acid, citric acid, and potassium bitartrate as a contraceptive. The ingredients are normal components of maternal blood and absorption from the vagina should be minimal. No special precautions are required during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Oral Levonorgestrel, Intrauterine Levonorgestrel, Levonorgestrel Implant, Medroxyprogesterone Acetate, Norethindrone, Progesterone

## Substance Identification

### Substance Name

Lactic Acid, Citric Acid, and Potassium Bitartrate

### CAS Registry Number

50-21-5; 77-92-9; 868-14-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents

Spermatocidal Agents